# Milk Thistle

CASRN: 84604-20-6

## Drug Levels and Effects

### Summary of Use during Lactation

Milk thistle (Silybum marianum) contains silymarin, which is a mixture of flavonolignans, mainly silibinin (also known as silybin), as well as silycristine, silydianin, quercetin and taxifolin.[1] Silymarin is a standardized preparation extracted from the fruits (seeds) of milk thistle. Milk thistle is a purported galactogogue,[2] and is included in some proprietary mixtures promoted to increase milk supply; however, no scientifically valid clinical trials support this use.[3-5] Although a study on the high potency purified milk thistle component, silymarin, and a phosphatidyl conjugate of silymarin indicated some galactogogue activity, this does not necessarily imply activity of milk thistle itself. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[6,7]

Limited data indicate that the silymarin components are not excreted into breastmilk in measurable quantities. Additionally, because silymarin components are poorly absorbed orally, milk thistle is unlikely to adversely affect the breastfed infant. Milk thistle and silymarin are well tolerated in adults with only mild side effects such as diarrhea, headache, and skin reactions. Mothers taking milk thistle to increase milk supply reported weight gain, nausea, dry mouth and irritability occasionally. Milk thistle might increase the metabolism of some drugs. Rarely, severe allergies and anaphylaxis are reported. Avoid in patients with known allergies to members of the aster (Compositea or Asteraceae) family, such as daisies, artichokes, common thistle, and kiwi because cross-allergenicity is possible.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Silibinin has low and variable bioavailability of 23 to 47% after oral administration and is rapidly converted into glucuronide conjugates that have longer half-lives in plasma than the unconjugated forms.[8]

Maternal Levels. Five mothers who had decided to stop nursing because their infants were 9 months old were given 600 mg of micronized silymarin (BIO-C brand) orally 3 times daily. After 5 days of therapy, milk was collected at unspecified times for analysis by HPLC. Silymarin flavonolignans were undetectable (<1 mcg/L) in milk samples; however, their conjugated forms might not have been detected by the assay method used.[9]

Silymarin metabolites (silychristin, silydianin, silibyn A, silibyn B, isosilybin A and isosilybin B) were not detected (<0.3 mg/kg) in breastmilk of any of 25 women studied on day 14 of treatment with micronized silymarin 252 mg (BIO-C) twice daily.[10]

Quercetin can be found in breastmilk of mothers with normal diets.[11] Milk samples from 17 nursing mothers on uncontrolled diets were taken at 1, 4 and 13 weeks postpartum at times between 10 am and 1 pm. Average quercetin levels in breastmilk were 48 nmol/L at week 1, 60 nmol/L at week 4 and 51 nmol/L at week 13. Kaempferol concentrations ranged from 7.8 to 71.4 nmol/L, increasing from weeks 1 to 13 (and from weeks 4 to 13. Because of the uncontrolled diet and varying sampling times, the range of values among individuals was large.[12]

Quercetin was measured in the milk of 11 mothers after they received an onion soup that contained either 0.8 or 1 mg/kg of quercetin glucosides. A baseline milk sample was obtained after a 5-day low-quercetin diet, and 7 milk samples were obtained over the 48 hours following soup ingestion. Baseline total (from conjugated and unconjugated) quercetin in breastmilk averaged 45 nmol/L. An average peak milk quercetin level of 68 nmol/L was attained at an average of 11.9 hours after the soup meal. The average half-life of quercetin in breastmilk was 50.3 hours.[13]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A study compared a commercial product containing silymarin 252 mg (BIO-C) to placebo every 12 hours in mothers of preterm (<32 weeks) infants. No adverse effects were observed in any of the infants.[10]

In a study of galactogogue containing 5 grams of a mixture of silymarin, phosphatidylserine and galega (goat's rue) in an unspecified proportion and from an unspecified source, none of the typical adverse effects of silymarin were noted in the breastfed infants.[14]

### Effects on Lactation and Breastmilk

No human data are available on the effect of milk thistle or its components on serum prolactin. A study in gilts (female domestic pigs) found that silymarin 4 grams twice daily during pregnancy and lactation found that serum prolactin levels were increased compared to gilts given placebo. The slight increase in prolactin had no effect on mammary gland development, nor on plasma progesterone or estradiol.[15]

A study was performed on 50 medically normal postpartum mothers with milk production judged to be less than normal for patients in the hospital in Lima, Peru where the study was conducted. Mothers were divided non-randomly into 2 groups of 25 women who had identical ages, weights, number of children and newborn's age, although ages were not reported. The group that was given micronized silymarin (BIO-C brand) 420 mg daily for 63 days had a baseline milk production of 602 mL daily. The milk volumes and composition (water, fats, carbohydrate and protein) of the 2 groups were not significantly different on day 0. The group given an identical placebo had a baseline milk production of 530 mL daily. Milk production was measured on day 30 and day 63 by infant weighing before and after nursing followed by emptying the breasts with a breast pump. The composition of the milk was also determined. Statistically significant differences in average milk production were found on day 30 (990 grams in the silymarin group and 650 grams in the placebo group) and on day 63 (1119 grams in the silymarin group and 701 grams in the placebo group). Milk composition was not different between the groups at the two time points.[9] Deficiencies in this study include the lack of randomization, no investigator blinding, and no optimization of breastfeeding technique prior to study enrollment. Also, breastfeeding duration and long-term infant growth were not studied.

In a randomized, double-blind study, a placebo (5 grams of lactose) or a commercial product (Piùlatte Plus, Milte) containing 5 grams of a mixture of silymarin, phosphatidylserine and galega (goat's rue) was given once daily to mothers of preterm infants. Phosphatidylserine purportedly improves the bioavailability of silymarin. The medication or placebo was given from day 3 to day 28 postpartum. Mothers pumped using a breast pump every 2 to 3 hours during the day and as desired at night. Milk production was measured on days 7, 14 and postpartum. Daily milk production averaged 200 mL in the treated group and 115 mL in the control group. The total amount of milk produced during 28 the study period and the proportion of women producing more than 200 mL daily was greater in the treated group than controls on days 7 and 28.[14] Mothers were contacted at 3 and 6 months postpartum concerning breastmilk production. Of the 89 mothers who responded satisfactorily at 3 months, more mothers who had received silymarin-galega were exclusively breastfeeding than those who received placebo (22/50 vs 12/50). Also, more mothers were feeding more than 50% breastmilk to their infants in the treatment group than the placebo group (29/50 vs 18/50). At 6 months postpartum, more mothers were feeding more than 50% breastmilk to their infants in the treatment group than in the placebo group (22/50 vs 12/50). These differences were statistically significant.[16]

A randomized study compared a commercial product containing micronized silymarin 252 mg (BIO-C) to placebo every 12 hours in mothers of preterm (<32 weeks) infants, beginning at 10 days postpartum. Mothers used a breast pump 6 times daily and measured milk output before beginning, 5 times during the 28 days of treatment, and on days 36 and 45. No difference in milk production was observed between the two groups at any time point. The mothers' guesses of whether they had taken placebo or silymarin were no better than chance.[10] An evidence-based medicine analysis of this study concluded that there is very low certainty evidence that micronized silymarin does not increase milk volume at day 28.[17]

In a survey of 188 nursing women from 27 states (52% from Louisiana), 24 had used milk thistle as a galactogogue. Of those who used it, 52% were not sure that it increased their milk supply and 4 reported unspecified side effects.[18]

In a survey of nursing mothers in Australia, 40 mothers were taking milk thistle as a galactogogue. On average, mothers rated milk thistle as being between “slightly effective” and “moderately effective” on a Likert scale. Ten percent of mothers taking milk thistle reported experiencing adverse reactions, most commonly weight gain, nausea, dry mouth and irritability.[19]

A retrospective study was performed in a Greek hospital on 161 mothers who were given Silitidil (a standardized extract consisted of 33% silymarin, 33% lecithin and 33% phosphatidylserine supplied as Piùlatte by Humana) 5 grams daily for 14 days. Mothers who were given Siltidil had twins or premature newborns, or whose neonates had weight loss greater than 10% of body weight, needed phototherapy, or required transport to a tertiary intensive care unit, and mothers who were unable to breastfeed due to any other reason. Telephone follow-up was done at 10 days, 1, 4 and 6 months. Breastfeeding rates (exclusive and nonexclusive) were 100% during their first week, 98.8% during the first month, 87% during the first 4 months, 56.5% at 6 months, 41% at 1 year and 19.3% over 1 year of age.[20] The retrospective nature of this study and lack of a control group, blinding, and characterization of breastfeeding, among other problems, make this paper impossible to interpret.

A double-blind placebo-controlled trial randomized mothers of preterm (32 weeks or less) infants to a product that contained 120 mg silymarin and 120 mg of phosphatidylserine (Silitidil, The Netherlands) or placebo. Of the 91 randomized mother-infant dyads, 68 (35 Siltidil, 46 placebo) completed the study per protocol. Their mean daily milk production at 21 days was 506 mL with the Siltidil and 523 mL for placebo, which was not statically significant. Pumping frequency and duration did not differ at any visit. There was no difference in the urinary prolactin/creatinine ratio before and after pumping and no correlation with milk production. The authors concluded that the silymarin product does not increase mean daily milk volume in mothers of premature infants of 32 weeks or less of gestation compared to placebo.[21]

A systematic review of randomized, controlled studies in the mothers of preterm neonates examined the efficacy of various herbal galactogogues in increasing milk supply. The authors concluded that a commercial product (Piùlatte®) containing silymarin with phosphatidylserine and galega (goat’s rue) produced a large increase in milk volume on day 4 postpartum, but low certainty evidence that it increases milk volume at day 7.[17]

### References

1 Dietz BM, Hajirahimkhan A, Dunlap TL, et al. Botanicals and their bioactive phytochemicals for women's health. Pharmacol Rev 2016;68:1026–73.27677719
2 Jackson PC. Complementary and alternative methods of increasing breast milk supply for lactating mothers of infants in the NICU. Neonatal Netw 2010;29:225–30.20630837
3 Forinash AB, Yancey AM, Barnes KN, et al. The use of galactogogues in the breastfeeding mother. Ann Pharmacother 2012;46:1392–404.23012383
4 Mortel M, Mehta SD. Systematic review of the efficacy of herbal galactogogues. J Hum Lact 2013;29:154–62.23468043
5 Zapantis A, Steinberg JG, Schilit L. Use of herbals as galactagogues. J Pharm Pract 2012;25:222–31.22392841
6 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
7 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
8 He SM, Li CG, Liu JP, et al. Disposition pathways and pharmacokinetics of herbal medicines in humans. Curr Med Chem 2010;17:4072–113.20939821
9 Di Pierro F, Callegari A, Carotenuto D, et al. Clinical efficacy, safety and tolerability of BIO-C (micronized silymarin) as a galactagogue. Acta Biomed 2008;79:205–10.19260380
10 Peila C, Coscia A, Tonetto P, et al. Evaluation of the galactogogue effect of silymarin on mothers of preterm newborns (<32 weeks). Pediatr Med Chir 2015;37:105.26714778
11 Williamson G, Clifford MN. A critical examination of human data for the biological activity of quercetin and its phase-2 conjugates. Crit Rev Food Sci Nutr 2025;65:1669–705.38189312
12 Song BJ, Jouni ZE, Ferruzzi MG. Assessment of phytochemical content in human milk during different stages of lactation. Nutrition 2013;29:195–202.23237648
13 Romaszko E, Wiczkowski W, Romaszko J, et al. Exposure of breastfed infants to quercetin after consumption of a single meal rich in quercetin by their mothers. Mol Nutr Food Res 2014;58:221–8.23963751
14 Zecca E, Zuppa AA, D'Antuono A, et al. Efficacy of a galactogogue containing silymarin-phosphatidylserine and galega in mothers of preterm infants: A randomized controlled trial. Eur J Clin Nutr 2016;70:1151–4.27245206
15 Farmer C, Lapointe J, Palin MF. Effects of the plant extract silymarin on prolactin concentrations, mammary gland development, and oxidative stress in gestating gilts. J Anim Sci 2014;92:2922–30.24504042
16 Serrao F, Corsello M, Romagnoli C, et al. The long-term efficacy of a galactagogue containing silymarin-phosphatidylserine and Galega on milk production of mothers of preterm infants. Breastfeed Med 2018;13:67–9.29148822
17 Cragg A, Levene I, Darabi S, et al. Herbal galactagogues to improve breastmilk production and lactation in mothers of preterm babies: A systematic review of clinical trials. Eur J Clin Nutr 2026;80:146–58.41350450
18 Bazzano AN, Cenac L, Brandt AJ, et al. Maternal experiences with and sources of information on galactagogues to support lactation: A cross-sectional study. Int J Womens Health 2017;9:105–13.28280392
19 McBride GM, Stevenson R, Zizzo G, et al. Use and experiences of galactagogues while breastfeeding among Australian women. PLoS One 2021;16:e0254049.34197558
20 Karapati E, Sulaj A, Krepi A, et al. Mothers in need of lactation support may benefit from early postnatal galactagogue administration: Experience from a single center. Nutrients 2021;14:140.35011014
21 Petersen H, Otten L, Foster J, et al. Efficacy of a herbal galactogogue in mothers of preterm infants ≤ 32 weeks of gestation. Clin Nutr ESPEN 2024;63:1133. doi:10.1016/j.clnesp.2024.07.491

## Substance Identification

### Substance Name

Milk Thistle

### Scientific Name

Silybum marianum

### CAS Registry Number

84604-20-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antioxidants

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal

Protective Agents